# Rotigotine

CASRN: 99755-59-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of rotigotine during breastfeeding, but it suppresses serum prolactin and may interfere with breastfeeding. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information in nursing mothers was not found as of the revision date. Rotigotine lowers serum prolactin.[1,2] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Daniel JS, Govindan JP, Kamath C, et al. Newer dopaminergic agents cause minimal endocrine effects in idiopathic Parkinson's disease. Clin Med Insights Endocrinol Diabetes 2014;7:13-7.24855402
2 Mastrangelo M, Giannini MT, Carducci CL, et al. Safety and efficacy of rotigotine in 7 patients with monoaminergic neurotransmitter deficiency. J Inherit Metab Dis 2016;39 (Suppl 1):S228. doi:10.1007/s10545-016-9969-2

## Substance Identification

### Substance Name

Rotigotine

### CAS Registry Number

99755-59-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Dopamine Agonists